# Flaxseed

## Drug Levels and Effects

### Summary of Use during Lactation

Flax (Linum usitatissimum) seed provides a nonabsorbable fiber which has been used as a laxative and has also been used topically to treat various skin conditions. Flaxseed oil contains alpha-linolenic acid (ALA), which is partially converted into the omega-3-fatty acids, docosahexaenoic acid (DHA) and eicosapentaenoic acid (EPA) in the body. Flaxseed oil increases the ALA content of breastmilk, but does not increase the DHA content. Maternal intake of preformed DHA, primarily derived from seafood or other marine oils, is required to increase breastmilk DHA content.[1,2] Flaxseed is generally well tolerated in adults, with occasional allergic skin reactions occurring. Very limited data exist on the safety and efficacy of flaxseed oil in nursing mothers or infants. However, supplementation of infant formula with ALA appears to improve the infant's DHA status.[3] Flaxseed used by the nursing mother as a laxative or topical poultice are not expected to adversely affect the breastfed infant. Flaxseed oil can be used during lactation, but is not effective in counteracting a low maternal DHA intake, as in vegetarian or vegan diets. Flax seed is a purported galactogogue,[4] but one study found that it was not effective.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Seven nursing women who were 2 to 11 months postpartum were given 4 weeks of supplementation with 20 grams flaxseed oil (10.7 grams of alpha-linolenic acid) daily after a 2-week washout period. The flaxseed oil was given as 1 gram capsules (Spectrum Essentials Veg-Omega 3 Cold Pressed Organic Flax Oil; Spectrum Naturals Inc., Petaluma, CA) in 3 divided doses. Ten breastmilk samples were collected at about the midpoint of nursing. Samples were collected at baseline, after the 2-week washout, weekly during supplementation, and for 4 weeks afterward. The ALA and docosapentaenoic acid (DPA) content of breastmilk increased markedly and EPA increased slightly during supplementation. The ALA content of milk reached a peak of 7.5% of fatty acids at the end of 4 weeks of supplementation and returned to near baseline of 1.9% after as little as one week after supplementation was discontinued. No increase in breastmilk DHA was seen during the study.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized, blinded trial compared lactation cookies containing oatmeal, brewer’s yeast, flax seeds, and fenugreek (Oatmeal Raisin Milkmakers Lactation Cookie Bites, Munchkin Inc.) were compared to similar cookies with no purported galactogogues (Famous Amos Chocolate Chip Cookies). Subjects were women nursing full-term 2-month-old infants (n = 176) and instructed to eat one bag of cookies daily for 30 days. They pumped their breasts completely with an electric pump at the start and end of the study. The milk production rate was 5.8 mL/hour in control participants and 5.5 mL/hour in the lactation cookie participants, which was not statistically significant difference.[6]

### References

1 Bourre JM. Dietary omega-3 fatty acids for women. Biomed Pharmacother 2007;61:105-12.17254747
2 Brenna JT, Salem N, Jr, Sinclair AJ, et al. Alpha-linolenic acid supplementation and conversion to n-3 long-chain polyunsaturated fatty acids in humans. Prostaglandins Leukot Essent Fatty Acids 2009;80:85-91.19269799
3 Udell T, Gibson RA, Makrides M. The effect of alpha-linolenic acid and linoleic acid on the growth and development of formula-fed infants: A systematic review and meta-analysis of randomized controlled trials. Lipids 2005;40:1-11.15825825
4 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
5 Francois CA, Connor SL, Bolewicz LC, et al. Supplementing lactating women with flaxseed oil does not increase docosahexaenoic acid in their milk. Am J Clin Nutr 2003;77:226-33.12499346
6 Palacios AM, Cardel MI, Parker E, et al. Effectiveness of lactation cookies on human milk production rates: A randomized controlled trial. Am J Clin Nutr 2023;117:1035-42.36921902

## Substance Identification

### Substance Name

Flaxseed

### Scientific Name

Linum usitatissimum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Laxatives

Oils

Phytotherapy

Plants, Medicinal